# Anise

## Drug Levels and Effects

### Summary of Use during Lactation

Anise (Pimpinella anisum) seeds contain anethole, which is a phytoestrogen as well as chlorogenic acid, naringenin, gallic acid, ellagic acid, taxifolin, coffeic acid, syringic acid, eugenol, trans-anethole, cis-anethole, methylchavicol, anisaldehyde, estragole, anisketone, linalool, coumarins, catechins, scopeletin, umbelliferone, estrols, and beta-farnesene. Anise is a purported galactogogue,[1-7] and is included in some proprietary mixtures promoted to increase milk supply; however, few scientifically valid clinical trials support this use. A meta-analysis concluded that anise produced a small increase in milk volume compared to no treatment on day 1 postpartum and there is low certainty evidence that anise tea increases milk volume on day 7.[8] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[9,10] Maternal anise ingestion reportedly imparts an odor to breastmilk,[11] possibly because anethole is excreted into breastmilk.[12] Studies on the exposure of nursing infants to cinnamon odor found no effect on growth parameters, whereas maternal odor and maternal milk odor may have an effect on infant weight gain.[13] Anise is "generally recognized as safe" (GRAS) as a flavoring by the U.S. Food and Drug Administration. Elevated liver enzymes occurred in a woman taking Mother's Milk Tea, which contains anise.[14] Excessive maternal use of an herbal tea containing anise and other herbs appeared to cause toxicity in two breastfed newborns, consistent with toxicity caused by anethole.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Eighteen lactating women were given 100 mg of trans-anethole in a capsule on 3 test days. Milk samples were collected every 2 hours for 8 hours starting at the time of ingestion. Trans-anethole was detected in milk at all collection times, with the average concentrations of 2 mcg/L at 0 hours, 9.9 mcg/L at 2 hours, 9.2 mcg/L at 4 hours, 7.3 mcg/L at 6 hours and 4.3 mcg/L at 8 hours after the dose. The average peak anethole concentration in milk was 23.2 mcg/L. Only small amounts of anethole glucuronide metabolites were present in the milk samples.[12]

Five women who were nursing infants between 6 and 55 weeks of age drank 950 mL of fennel-anise-caraway tea (Messmer Ostfriesische Tee Gesellschaft Laurens Spethmann GmbH & Co. KG, Seevetal, Germany). The main odorant components of the tea are the following terpenes: limonene, 1,8-cineole, fenchone, estragole, carvone, trans-anethole, p-anisaldehyde and anisketone. Mothers collected milk samples 30 minutes, 1 and 2 hours after ingesting the tea. Ingestion of the tea did not increase the overall terpene content of the milk, but there was wide variation from mother to mother. Some mothers had high background levels of some terpenes, probably from other foods or person care products. In addition, a sensory panel found no significant change in the odor profile of the breastmilk samples compared to blank samples.[15]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[15]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 35 mg of linalool and 1.1 mg of eugenol. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. Linalool reached its maximum concentration in milk after 1 hour in eleven participants, after 2 hours in six, after 3 hours in two participants, while in one participant, the maximum was not clearly determinable. Peak milk linalool concentrations ranged from 4.13 to 18.91 mcg/L. Linalool concentrations averaged 40% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated linalool into milk. Eugenol reached its maximum concentration in milk after 1 hour in two participants, after 2 hours in two participants, after 3 hours in three participants, after 4 hours in one participant after 5 hours in two participants, after 6 hours in three participants and after 8 hours in three participants. In seven participants, eugenol was not detected in milk. Peak milk eugenol concentrations ranged from 0.29 to 11.43 mcg/L. Eugenol concentrations averaged 200% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated eugenol into milk.[16]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two breastfed infants, aged 15 and 20 days, were admitted to the hospital for a reported lack of weight gain in the previous 7 to 10 days, caused by "difficult feeding". The parents reported restlessness and vomiting during the past day. One of the mothers also reported feeling drowsy and weak. On examination, the infants were afebrile but had hypotonia, lethargy, emesis, weak cry, poor sucking and weak responses to painful stimuli. Infant laboratory values, electrocardiograms and blood pressures were normal, and septic work-ups were negative. Both mothers had both been drinking more than 2 liters daily of an herbal tea mixture reportedly containing licorice, fennel, anise, and goat's rue to stimulate lactation. After the mothers discontinued breastfeeding and the herbal tea, the infants improved within 24 to 36 hours. Symptoms of the affected mother resolved rapidly after discontinuing the herbal tea. After 2 days, breastfeeding was reinstituted with no further symptoms in the infants. Both infants were doing well at 6 months of age. The authors attributed the maternal and infant symptoms to anethole, which is found in both anise and fennel; however, the anethole levels were not measured in breastmilk, nor were the teas tested for their content.[17]

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk Tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk Tea bag contained 350 mg of anise fruit as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[18]

### Effects on Lactation and Breastmilk

A group of 5 nursing mothers were given no herb for 5 days, 15 mL of a 5% infusion of anise 3 times daily for 10 days, followed by another 5-day control period from days 15 to 20. Their diet and environment were kept constant during the study period. Milk volume was measured daily, and milk fat percentage was measured on days 5, 10, 15 and 20. The increase in milk volume was variable, from substantial increases to no effect to decreases in volume at the end of the study period. No overall changes in milk fat were observed.[19] Because of the lack of randomization, blinding and controls, and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of anise.

In an uncontrolled, nonblinded study, 5 nursing mothers were given 4 cups of anise tea (preparation method not stated) daily to determine if milk production was improved. The measured endpoint was duration of lactation in the current pregnancy compared to the previous pregnancy based on maternal reporting. Treated women had trivial increases in duration of lactation from 10 days in the previous pregnancy to 15 days with use of the tea.[20] Because of the faulty study design and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of anise.

One hundred fifty-eight mothers in Iran of who reported difficulty in breastfeeding were given either a proprietary mixture of herbs (Shirafza Drop) or a chlorophyll solution as a placebo. The herbal mixture contained the purported galactogogues fennel, anise, cumin, black seed, and parsley. Infant ages ranged between 0 and 6 months and they were exclusively breastfed. Weight gain of the infants was measured over time. No difference in infant weight gain was seen between the two groups of infants.[21] Blinding and randomization in this study is unclear.

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as melissa, caraway, anise, fennel, goat's rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse, and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mother used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[22] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

Mothers of preterm infants (<32 weeks) were randomized to receive either 2 grams of dried anise plant plus 1 gram of black tea (n = 45), placebo consisting of 3 grams of black tea (n = 45) 3 times daily for 1 week, or to a control group that received no intervention (n = 39). Mothers pumped their milk for tube feeding to their infants in the ICU. Mothers who received anise spent more time and pumped more frequently than the other groups, presumably because of greater milk production. There was a statistically significant difference in milk volume in the first, third, fourth, fifth, sixth and seventh days between the three groups, with the differences between the anise group and the other groups increasing with time. However, there was no statistically significant difference in the weights of the infants on days 0, 3 and 7. No long-term follow-up was performed.[23] The study was incompletely blinded, but was otherwise generally well performed.

A meta-analysis of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that Pimpinella anisum produced a small increase in milk volume compared to no treatment on day 1 postpartum and there is low certainty evidence that Pimpinella anisum tea increases milk volume on day 7. Additionally the authors concluded that there is low certainty evidence that ‘Hipp Natal®’ granules containing 1% stinging nettle, Pimpinella anisum and five other herbs increased milk volume at day 7.[8]

### References

1 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54–8.19161049
2 Dennehy C, Tsourounis C, Bui L, et al. The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs 2010;39:684–93.21044150
3 Alachkar A, Jaddouh A, Elsheikh MS, et al. Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun 2011;6:79–84.21366051
4 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
5 Javan R, Javadi B, Feyzabadi Z. Breastfeeding: A review of its physiology and galactogogue plants in view of traditional Persian medicine. Breastfeed Med 2017;12:401–9.28714737
6 Sibeko L, Johns T. Global survey of medicinal plants during lactation and postpartum recovery: Evolutionary perspectives and contemporary health implications. J Ethnopharmacol 2021;270:113812.33450288
7 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
8 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450
9 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
10 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
11 Dreyfus-See G. Le passage dans le lait des aliments ou medicaments absorbes par les nourrices. Rev Med 1934;51:198–213.
12 Hausner H, Bredie WL, Mølgaard C, et al. Differential transfer of dietary flavour compounds into human breast milk. Physiol Behav 2008;95:118–24.18571209
13 Bali Bilgi O, Acikgoz A, Cakirli M. The effect of olfactory stimulation on growth parameters in newborn infants: A systematic review. Breastfeed Med 2025;20:94–101.39659255
14 Silverman AL, Kumar A, Borum ML. Re: "Herbal use during breastfeeding" by Anderson (Breastfeed Med 2017;12(9):507-509). Breastfeed Med 2018;13:301.29757695
15 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
16 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
17 Rosti L, Nardini A, Bettinelli ME, et al. Toxic effects of a herbal tea mixture in two newborns. Acta Paediatr 1994;83:683.7919774
18 Wagner CL, Boan AD, Marzolf A, et al. The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact 2019;35:248–60.30005170
19 Nikolov P, Avramov NR. Investigations on the effect of Foeniculum vulgare, Carum carvi, Anisum vulgare, Crataegus oxyacanthus, and Galga officinalis on lactation. Izv Meditsinskite Inst Bulg Akad Naukite Sofia Otd Biol Meditsinski Nauki 1951;1:169–82.14888359
20 Nóbrega S, Francenely N. Aniseed and its galactogenous effect. An experimental study. Rev Bras Enferm 1983;36:163–77.6566378
21 Shariati M, Mamoori GA, Khadivzade T. The survey of effect of using "Shirafza Drop" by nursing mothers on weight gain (WG) of 0-6 months exclusively breastfed. Horizon Med Sci 2004;10:24–30. http://imtj.gmu.ac.ir/article-1-255-en.html
22 Özalkaya E, Aslandogdu Z, Ozkoral A, et al. Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38–42.29411721
23 Khalili S, Amiri-Farahani L, Haghani S, et al. The effect of Pimpinella anisum herbal tea on human milk volume and weight gain in the preterm infant: A randomized controlled clinical trial. BMC Complement Med Ther 2023;23:19.36681821

## Substance Identification

### Substance Name

Anise

### Scientific Name

Pimpinella anisum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal